# Epinastine

CASRN: 80012-43-7

## Drug Levels and Effects

### Summary of Use during Lactation

Evidence from 7 individuals indicates that transfer of epinastine into breastmilk and the resulting infant serum levels are likely to be minimal and unlikely to cause adverse effects in breastfed infants. In the U.S., epinastine is only available as eye drops. Because absorption from the eye is limited, epinastine would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Seven nursing mothers who had taken oral epinastine 20 mg once daily for at least 7 days donated milk samples at 2, 4 and 10 hours after their daily dose. Average milk levels were 17.6 mcg/L at 2 hours, 31.0 mcg/L at 4 hours and 17.2 mcg/L at 10 hours after the dose.[1] Using the highest average milk level (at 4 hours), the maximum dose that an infant might obtain through breastmilk is 2.6 mcg/kg daily or 8.2% of the maternal weight-adjusted dosage. However, if the 2 and 10-hour milk levels are used, the average infant dosage would be 4.6% of the maternal weight-adjusted dosage.

Infant Levels. Two infants who were almost exclusively breastfed were nursed by mothers who had taken oral epinastine 20 mg once daily for at least 7 days. Their plasma epinastine levels were under the quantification limit of the assay, but estimated to be 0.0189 and 0.0449 mcg/L.[1] These values correspond to 0.2% and 0.3% of maternal plasma levels, respectively.

### Effects in Breastfed Infants

In a study of 7 nursing mothers who were taking oral epinastine 20 mg once daily. No adverse reactions in the infants were reported.[1]

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women. However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[2,3] The prolactin level in a mother with established lactation may not affect her ability to breastfeed. Low ophthalmic doses of epinastine are unlikely to have the same effect on serum prolactin.

### References

1 Iwasa C, Zaima K, Metori K, et al. Transfer of epinastine to infants through human breast milk. Pharmazie 2019;74:732-6.31907112
2 Messinis IE, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
3 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996

## Substance Identification

### Substance Name

Epinastine

### CAS Registry Number

80012-43-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines